# Sulbactam and Durlobactam

CASRN: 68373-14-8; 1467829-71-5

SID: 390610971; 394527098

## Drug Levels and Effects

### Summary of Use during Lactation

Sulbactam produces low levels in milk that are not expected to cause adverse effects in breastfed infants. It is likely that durlobactam produces similar levels in milk. Occasionally, disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, have been reported with penicillins, but these effects have not been adequately evaluated. Sulbactam-durlobactam is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. No information is available about the passage of durlobactam into milk.

A study in postpartum women with endometritis who received ampicillin 1 gram plus sulbactam 0.5 gram or ampicillin 2 grams plus 1 gram of sulbactam infused intravenously over 20 minutes found the average milk levels of ampicillin to be 1.7 mg/L with the highest level observed 3 mg/L. Sulbactam milk levels averaged 0.58 mg/L with the highest level observed 2.8 mg/L.[1]

Milk was collected at random times after 0.5 or 1 gram doses of sulbactam infused intravenously over 20 minutes. Little fluctuation occurred in milk levels over the first 8 hours after the dose with little difference in milk levels between the two dosages. Milk levels averaged 0.52 mg/L during this period with the highest level being 2.8 mg/L. Other levels from 10.5 to 20.5 hours after the dose ranged from 0.12 to 1.2 mg/L.[2] It is unclear whether some of the patients in this report were the same as those in reference[1].

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Foulds G, Miller RD, Stankewich JP, et al. The pharmacokinetics of subactam and ampicillin in postpartum women. In, Spitzy KH, Karrer K, eds. Proc 13th Int Congress Chemother 1983;1:23/17-23/22.
2 Foulds G, Miller D, Knirsch AK, Thrupp LD. Sulbactam kinetics and excretion into breast milk in postpartum women. Clin Pharmacol Ther 1985;38:692-6.2998677

## Substance Identification

### Substance Name

Sulbactam and Durlobactam

### CAS Registry Number

68373-14-8; 1467829-71-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anti-Bacterial Agents

Penicillins

beta-Lactamase Inhibitors